# Irinotecan

CASRN: 97682-44-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that irinotecan is found in breastmilk for 2 days and its active metabolite is found in breastmilk for up to a week after a dose of 60 mg/square meter, although the highest amounts occur during the first 4 days after a dose. Higher maternal doses have not been studied and the oral absorption and toxicity in breastfed infants are not known. Based on this limited evidence, it appears that breastfeeding should be avoided for at least a week after a dose of irinotecan 60 mg/square meter. Higher dosages probably require a longer abstinence period. Some authors recommend discontinuing breastfeeding during irinotecan therapy.[1] Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[3]

### Drug Levels

Irinotecan is metabolized to the active metabolite, 7-ethyl-10-hydroxycamptothecin (SN-38), which is further conjugated with glucuronic acid.

Maternal Levels. A woman with cervical cancer discovered during pregnancy was treated with irinotecan 60 mg/square meter plus nedaplatin 80 mg/square meter. She had been nursing her infant prior to chemotherapy and collected morning breastmilk samples on days 2 to 7 following the first dose of irinotecan. Irinotecan was detectable in breastmilk on days 2 and 3 after the dose in concentrations of 399 and 60.21 mcg/L, respectively. Irinotecan was undetectable (<0.1 mcg/L) on day 4 and after. SN-38 was also measured, but not its glucuronide. SN-38 was highest in breastmilk on day 2, with a concentration of 3.9 mcg/L. Levels fell, but were still measurable on days 6 and 7, with concentrations of 0.16 and 0.2 mcg/L, respectively.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Nakagawa J, Terui K, Hosoi K, et al. Passage of irinotecan and its active metabolite, SN-38, into human milk. J Clin Pharm Ther 2016;41:579-82.27477206
2 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
3 Stopenski S, Aslam A, Zhang X, et al. After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91-7.28170295

## Substance Identification

### Substance Name

Irinotecan

### CAS Registry Number

97682-44-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Topoisomerase I Inhibitors